# Diphtheria-Tetanus-Pertussis Vaccines

## Drug Levels and Effects

### Summary of Use during Lactation

The Centers for Disease Control and Prevention and other expert opinion state that vaccines given to a nursing mother do not affect the safety of breastfeeding for mothers or infants and that breastfeeding is not a contraindication to tetanus, diphtheria, and pertussis (Tdap) vaccine.[1,2] Women are recommended to received Tdap with every pregnancy, which decreases the infant’s risks of hospitalization and ICU admission, and results in shorter hospital stays than in infants whose mothers were not vaccinated. Infants of mothers who receive Tdap during breastfeeding have no increased healthcare needs and grow normally.

Anti-pertussis antibodies in human milk survive infant digestion and may contribute to the protection provided to the infant against pertussis infection,[3-5] but conflicting results have been reported on whether breastfeeding offers additional protection from pertussis compared to administration in pregnancy alone.[6,7] Women vaccinated after 20 weeks of gestation have higher antipertussis IgA and IgG levels in their breastmilk than those who are not vaccinated. Women, including nursing mothers, who have not received acellular pertussis vaccine with Tdap previously should be vaccinated with Tdap immediately postpartum.[3,8] After vaccination, antipertussis antibodies appear in breastmilk within 1 to 2 weeks and persist for at least 6 months. Breastfeeding appears to reduce infant side effects associated with routine childhood immunization. Breastfed infants should be vaccinated according to the routine recommended schedules.

### Drug Levels

Maternal Levels. Thirty-nine women who were within 24 hours postpartum received 0.5 mL of Tdap vaccine (Adacel, Sanofi Pasteur) and 11 received no vaccine. Colostrum or breast milk and blood samples were collected at baseline and 7, 10, 14, and 28 days after vaccination. Breastmilk IgA levels against pertussis toxoid peaked at day 10 postpartum, then slowly decreased. Breast milk antibody levels against the other antipertussis vaccine components, filamentous hemagglutinin and fimbriae types 2 and 3, reached a plateau during days 10 to 14 and then slowly decreased. Breast milk antibody levels against another antipertussis vaccine component, pertactin, peaked on day 14 and then decreased by day 28.[9]

The milk of 25 pregnant women given Tdap vaccine (Boostrix, GlaxoSmithKline) after 20 weeks of pregnancy was compared to colostrum from 12 unvaccinated women. Milk samples were collected prior to discharge after delivery (colostrum) and at 2, 4 and 8 weeks postpartum. Vaccinated women had significantly higher antipertussis antibody levels in their breastmilk than unvaccinated women. The primary class of immunoglobulins was IgA, which were highest in colostrum, but still detectable at 8 weeks.[10]

Total and anti-pertussis toxin secretory IgA (sIgA) levels were measured in breastmilk from women who had been vaccinated either during pregnancy (n = 19), at or shortly after delivery (n = 34), less than 5 years before delivery (n = 9), or more than 5 years before delivery (n = 12). Tdap vaccine (Boostrix, GlaxoSmithKline) was used in the first 3 groups. Breastmilk samples were obtained between 44 and 91 days postpartum. No difference in total sIgA was found between the groups, but women who were vaccinated during pregnancy or shortly after birth had higher anti-pertussis toxin levels of sIgA than those vaccinated more than 5 years before. Higher anti-pertussis toxin sIgA levels were found among women practicing mixed feeding than among exclusively breastfeeding mothers.[11]

A study compared breastmilk antibody levels in mothers who were or were not vaccinated with Tdap (Boostrix, GSK) at 24 to 32 weeks of pregnancy. Results were also separated into those who delivered at term and those who delivered preterm. Blood and milk samples were collected in the first 72 hours postpartum, then at 4, 8 and 12 weeks postpartum. After preterm delivery, breastmilk contained antipertussis IgA and IgG levels comparable to those after term delivery. Milk after preterm delivery contained colostrum antipertussis IgA of 5.39 IU/mL compared with 6.69 IU/mL in mothers who delivered at term. Maternal vaccination during pregnancy induced higher antipertussis IgG levels in colostrum of vaccinated than in unvaccinated women delivering at term (0.110 IU/mL vs 0.027 IU/mL). Some women who were not vaccinated during pregnancy were vaccinated postpartum. In those women, antibody levels at 4 weeks postpartum were equal to those of women vaccinated during pregnancy. Antipertussis antibodies persisted until at least 12 weeks postpartum.[12]

A study measured IgG levels against several antigens (tetanus and diphtheria toxoids, B. pertussis toxin, filamentous hemagglutinin, pertactin, and fimbriae) in 15 women in the US who were given Tdap during pregnancy and 26 women in Malawi who were given only tetanus vaccination during pregnancy. Women living in the US had higher antibody levels than those in mothers living in Malawi for all antigens tested except for tetanus. The study also followed women given Tdap (Adacel) at various times postpartum. Vaccine-specific IgG and IgA were detected in breast milk from 18 women at 2 weeks, 31 women at 6 weeks, and 19 women at 6 months after vaccination. The highest antibody concentrations were detected 2 weeks post-vaccination (the first time point tested). Antibodies in breastmilk decreased 1.5 months after vaccination and even further at 6 months. For all antigens, breast milk IgG and IgA concentrations 6 months post-vaccination were significantly lower than those at 2 weeks post-vaccination. IgG titers in breastmilk were lower than those measured in serum, but there was a strong correlation between peak IgG titers in both compartments.[13]

A study compared the concentrations of pertussis-specific antibodies in colostrum and breastmilk at 14 days postpartum between three different administration times during pregnancy: either before 24 weeks, between 24 and 27+6 weeks or between 28 and 31+6 weeks. No difference in IgA concentrations was found between the groups in colostrum or milk. Concentrations at 14 days dropped by over 97% for all antigens in all groups, with some undetectable at that time in many subjects.[14]

Infant Levels. A study of 338 children in Greenland between 7.1 and 12.1 years old found the median concentrations of tetanus and diphtheria antibodies to be 0.92 and 0.07 IU/mL. Most (72%) of children had been breastfed at least 6 months, and only 7 children (2%) were never breastfed. Forty-two (12%) had tetanus concentrations below the protective limit and 175 (52%) had diphtheria concentrations below the limit. Exposure to marine environmental contaminants such as mercury, PCBs and perfluoro compounds were associated with markedly reduced odds of having diphtheria antibodies above the protective level.[15]

### Effects in Breastfed Infants

Breastfeeding can enhance the response of the infant to certain vaccine antigens,[1,16] including tetanus toxoid and pertussis.[17,18] Breastfed infants are also less likely to have fever and may be less likely to experience anorexia and reduced energy intake after routine childhood immunization than those who are not breastfed.[19,20]

A study in the United States of mothers who did not receive Tdap vaccine during pregnancy found that their infants who received breastmilk with 1 formula feeding or fewer daily decreased pertussis risk by about 75% compared with infants receiving more formula.[18]

One study of previously vaccinated infants found that at 21 to 40 months of age breastfed infants had higher IgG levels against diphtheria, higher secretory IgA levels in saliva against diphtheria and tetanus and higher fecal IgM against tetanus than formula-fed infants.[21]

A case-control study in Brazil found that exclusive breastfeeding of infants under 6 months of age protected them against pertussis-like illness. Protection was enhanced if the mother had been vaccinated against pertussis during pregnancy.[22]

A study in Sweden compared the IgG response to diphtheria, tetanus and pertussis vaccine in infants who were either breastfed or randomized to one of 3 different formulas. In a secondary analysis of the results, breastfed infants had significantly lower IgG levels against diphtheria and pertussis at 6, and 12 months than formula-fed infants. A significantly higher proportion of the formula-fed infants showed diphtheria IgG concentrations above the protective levels at 6, and 12 months. For tetanus, proportions of infants above the protective levels were similar for formula-fed and breastfed infants. The authors could not explain the differences, but felt that the clinical relevance of different IgG responses is most likely limited.[23]

A retrospective cohort study using electronic health records from two US healthcare systems identified 3034 and 3191 lactating individuals eligible for infant growth and healthcare utilization analyses, respectively. No correlation was found between receiving Tdap during lactation and infant growth or use of healthcare.[24]

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### References

1 Kroger A, Bahta L, Long S, . CDC. General Best Practices for Immunization. 2024. https://www.cdc.gov/vaccines/hcp/acip-recs/general-recs/index.html
2 Jamieson DJ, Munoz FM, Rasmussen SA. Maternal immunization. Obstet Gynecol 2026;147:661-78.41712936
3 Anon. Updated recommendations for use of tetanus toxoid, reduced diphtheria toxoid, and acellular pertussis vaccine (Tdap) in pregnant women-Advisory Committee on Immunization Practices (ACIP), 2012. MMWR Morb Mortal Wkly Rep 2013;62:131-5.23425962
4 Hunagund S, Golan Y, Asiodu IV, . Effects of vaccination against influenza, pertussis, and COVID-19 on human milk antibodies: Current evidence and implications for health equity. Front Immunol 2022;13:910383.35903100
5 Demers-Mathieu V, Huston RK, Markell AM, . Impact of pertussis-specific IgA, IgM, and IgG antibodies in mother’s own breast milk and donor breast milk during preterm infant digestion. Pediatr Res 2021;89:1136-43.32599609
6 Pandolfi E, Gesualdo F, Carloni E, . Does breastfeeding protect young infants from pertussis? Case-control study and immunologic evaluation. Pediatr Infect Dis J 2017;36:e48-e53.27870812
7 Bellido-Blasco J, Guiral-Rodrigo S, Miguez-Santiyán A, . A case-control study to assess the effectiveness of pertussis vaccination during pregnancy on newborns, Valencian community, Spain, 1 March 2015 to 29 February 2016. Euro Surveill 2017;22:30545.28598324
8 Murphy TV, Slade BA, Broder KA, . Prevention of pertussis, tetanus and diphtheria among pregnant and postpartum women and their infants. Recommendations of the Advisory Committee on Immunization Practices (ACIP). MMWR Recomm Rep 2008;57 (RR-4):1-51.
9 Halperin BA, Morris A, Mackinnon-Cameron D, . Kinetics of the antibody response to tetanus-diphtheria-acellular pertussis vaccine in women of childbearing age and postpartum women. Clin Infect Dis 2011;53:885-92.21946190
10 Abu Raya B, Srugo I, Kessel A, . The induction of breast milk pertussis specific antibodies following gestational tetanus-diphtheria-acellular pertussis vaccination. Vaccine 2014;32:5632-7.25148774
11 De Schutter S, Maertens K, Baerts L, . Quantification of vaccine-induced antipertussis toxin secretory IgA antibodies in breast milk: Comparison of different vaccination strategies in women. Pediatr Infect Dis J 2015;34:e149-52.25719454
12 Orije MRP, Larivière Y, Herzog SA, . Breast milk antibody levels in Tdap vaccinated women after preterm delivery. Clin Infect Dis 2021;73:e1305-e13.33768227
13 Portillo S, Oshinsky J, Williams M, . Quantitative analysis of pertussis, tetanus, and diphtheria antibodies in sera and breast milk from Tdap vaccinated women using a qualified multiplex assay. mSphere 2024;9:e0052723.38497618
14 Daniel O, Loughnan M, Quenby M, . Antibody in breastmilk following pertussis vaccination in three-time windows in pregnancy. Pediatr Infect Dis J 2025;44:S66-S9.39951360
15 Timmermann CAG, Pedersen HS, Weihe P, . Concentrations of tetanus and diphtheria antibodies in vaccinated Greenlandic children aged 7-12 years exposed to marine pollutants, a cross sectional study. Environ Res 2021;203:111712.34343554
16 Pabst HF. Immunomodulation by breast-feeding. Pediatr Infect Dis J 1997;16:991-5.9380478
17 Perin MC, Schlindwein CF, de Moraes-Pinto MI, . Immune response to tetanus booster in infants aged 15 months born prematurely with very low birth weight. Vaccine 2012;30:6521-6.22959983
18 Curtis CR, Baughman AL, DeBolt C, . Risk factors associated with Bordetella pertussis among infants ≤4 months of age in the pre-Tdap era: United States, 2002-2005. Pediatr Infect Dis J 2017;36:726-35.28033240
19 Pisacane A, Continisio P, Palma O, . Breastfeeding and risk for fever after immunization. Pediatrics 2010;125:e1448-52.20478932
20 López-Alarcón M, Garza C, Habicht JP, . Breastfeeding attenuates reductions in energy intake induced by a mild immunologic stimulus represented by DPTH immunization: possible roles of interleukin-1beta, tumor necrosis factor-alpha and leptin. J Nutr 2002;132:1293-8.12042449
21 Hahn-Zoric M, Fulconis F, Minoli I, . Antibody responses to parenteral and oral vaccines are impaired by conventional and low protein formulas as compared to breast-feeding. Acta Paediatr Scand 1990;79:1137-42.2085099
22 Nascimento RMD, Baptista PN, Lopes KAM, . Protective effect of exclusive breastfeeding and effectiveness of maternal vaccination in reducing pertussis-like illness. J Pediatr (Rio J) 2021;97:500-7.33465336
23 Björmsjö M, Ekström N, Silfverdal SA, . Vaccine response was higher in formula-fed infants compared to breastfed but not affected by lactoferrin or iron in a randomised controlled trial. Acta Paediatr 2024;113:2266-74.38934330
24 Palmsten K, Cao J, Vazquez-Benitez G, . Assessment of infant growth and health care utilization following tetanus, diphtheria, pertussis (Tdap) vaccination during pregnancy and lactation. Vaccine 2026;92:129123.42702141

## Substance Identification

### Substance Name

Diphtheria-Tetanus-Pertussis Vaccines

### Drug Class

Breast Feeding

Lactation

Milk, Human

Vaccines